# Dill

CASRN: 8006-75-5

## Drug Levels and Effects

### Summary of Use during Lactation

Dill (Anethum graveolens) seeds contain essential oil rich in carvone and limonene, in addition to phenolics, such as trans-anethole, and flavonoids. Dill is a purported galactogogue.[1-6] No scientifically valid clinical trials support this use, and one small, old study found no galactogogue effect of a primary dill component, d-carvone.[7] Dill is one component of an herbal mixture that showed some evidence of galactogogue efficacy.[8] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[9,10] Two studies found small, but measurable amounts of d-carvone in the milk of mothers given the chemical experimentally. Dill is "generally recognized as safe" (GRAS) as a food by the U.S. Food and Drug Administration. It is generally well tolerated, but occasional allergic skin reactions have been reported, especially after contact with fresh dill. In two studies, nursing mothers were given d-carvone. No adverse effects were noted in the mothers or infants.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Twenty mothers consumed 30 mg of d-carvone in 75 grams of hummus every third day for 28 days (10 exposures) at about 2 hours before a "usual" nursing time. Breastmilk samples were obtained 2 hours after ingestion on the first and last days of carvone intake. Carvone was detectable in the milk of 18 mothers. Average carvone concentrations in breastmilk were 2.5 mcg/L and 3.8 mcg/L on the first and last days of sampling, respectively. However, these values did not differ statistically, and the combined average carvone concentration was 3.2 mcg/L. A control group of 20 women who did not ingest d-carvone had no detectable carvone in their breastmilk.[7]

Eighteen lactating women were given 100 mg of d-carvone mixed with lactose and talc in a capsule on 3 test days. Milk samples were collected every 2 hours for 8 hours starting at the time of ingestion. Carvone was detected in milk at all collection times, with the average concentrations of 1.3 mcg/L at 0 hours, 7.2 mcg/L at 2 hours, 5.6 mcg/L at 4 hours, 4.3 mcg/L at 6 hours and 2.7 mcg/L at 8 hours after the dose. The average peak carvone concentration in milk was 10.5 mcg/L. Carvone metabolites were not detected in any milk samples.[11]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A study compared 3 groups of women. One group of 20 nursing mothers consumed 30 mg of d-carvone in 75 grams of hummus every third day for 28 days (10 exposures) at about 2 hours before a "usual" nursing time. A second group of 20 nursing mothers followed the same regimen, but their hummus contained no d-carvone. A third group of 8 mothers received the d-carvone flavored hummus, but were exclusively formula feeding their infants. After this 28-day period, both groups of breast-fed infants showed greater acceptance of d-carvone-flavored mashed potatoes than the formula-fed infants who preferred the unflavored potatoes. The authors interpreted these results to mean that breastfed infants are more receptive to a wide array of flavors than formula-fed infants.[7]

### Effects on Lactation and Breastmilk

A convenience sample of 60 women whose infants were admitted to the neonatal ICU were given either nothing (n = 30) or dill seeds tea (containing 1 tablespoon of dill seeds, 200 mL of water, 1 tablespoon jaggery (unrefined sugar), and half a tablespoon of cow ghee) daily in the morning for 5 days. Mothers responded to a questionnaire related to suckling sufficiency using a Likert scale. A statistically significant improvement in lactation was reported among the women given the dill seed tea.[5] However, the lack of randomization, blinding and a placebo control diminish the validity of this study.

A commercial preparation containing wild asparagus 2 grams, dill 1.5 grams, cumin 1 gram, and cardamom 0.5 grams (Ayush-SS granules, Central Council for Research Ayurveda & Siddha, India) per dose was studied in a randomized double-blind trial in Indian mothers whose infants were experiencing “insufficient lactation”. This dose was given twice daily for 12 weeks beginning when full-term infants failed to regain their birth weight by 14 days postpartum, exhibited a weight gain of less than 20 grams daily between days 15 and 90 of life, or had fewer than six urinations per day. A per-protocol analysis (dropout rate 22%) found that at six months, 74 of 106 (70%) infants in the Ayush-SS group were exclusively breastfed, compared to 47 of 105 (45%) in the placebo group. After 90 days, 81 of 106 infants (77%) in the Ayush-SS group gained at least 20 grams per day compared to 44 of 105 (41.8%) in the placebo group. Maternal perceptions of insufficient lactation were lower in the Ayush-SS group (15% vs. 58%). All of these differences were statistically significant. No severe adverse events related to the intervention were observed.[8] The study was well designed and performed, but no intent-to-treat analysis was performed.

### References

1 Low Dog T. The use of botanicals during pregnancy and lactation. Altern Ther Health Med 2009;15:54-8.19161049
2 Javan R, Javadi B, Feyzabadi Z. Breastfeeding: A review of its physiology and galactogogue plants in view of traditional Persian medicine. Breastfeed Med 2017;12:401-9.28714737
3 Alachkar A, Jaddouh A, Elsheikh MS, et al. Traditional medicine in Syria: Folk medicine in Aleppo governorate. Nat Prod Commun 2011;6:79-84.21366051
4 Kaygusuz M, Gümüştakım RŞ, Kuş C, et al. TCM use in pregnant women and nursing mothers: A study from Turkey. Complement Ther Clin Pract 2021;42:101300.33412511
5 Patel V, Prakasam A, Patel CH, et al. Effect of dill seed tea on lactation among postnatal mothers admitted in tertiary care hospital. Journal of Natural Remedies 2023;23:1141-4. doi:10.18311/jnr/2023/33453
6 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
7 Hausner H, Nicklaus S, Issanchou S, et al. Breastfeeding facilitates acceptance of a novel dietary flavour compound. Clin Nutr 2010;29:141-8.19962799
8 Saxena U, Ota S, Rajput S, et al. Clinical evaluation of Ayush-SS granules in exclusively breastfeeding mothers with insufficient lactation: A randomized, double-blind, placebo-controlled trial. Int Breastfeed J 2025;20:26.40188102
9 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
10 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
11 Hausner H, Bredie WL, Mølgaard C, et al. Differential transfer of dietary flavour compounds into human breast milk. Physiol Behav 2008;95:118-24.18571209

## Substance Identification

### Substance Name

Dill

### Scientific Name

Anethum graveolens

### CAS Registry Number

8006-75-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal